# Iron Salts

CASRN: 7439-89-6

## Drug Levels and Effects

### Summary of Use during Lactation

Iron is a normal component in human milk. Daily oral iron intake from prenatal vitamins or other multimineral supplements does not affect milk iron levels. Higher daily oral iron dosing has a minimal effect on milk iron levels and is not expected to cause harm to the breastfed infant if needed to treat the mother’s anemia, but it is not an adequate substitute for direct infant iron supplementation to prevent or treat infant anemia.

### Drug Levels

Iron is normally present in human breastmilk, with higher concentrations in hindmilk.[1] One-third of milk iron is found in the fat fraction bound to metalloproteins in the outer membrane of fat globules. Most of the remainder is in the whey fraction bound mostly to lactoferrin, but also to other proteins such as transferrin and to smaller ligands. About 10% of milk iron is bound to casein.[2] Quantities are highest in colostrum, and they decrease as lactation progresses. Reported average milk iron levels in the first postpartum week are about 1 mg/L, decreasing to a range of 0.4 to 0.9 mg/L during the first postpartum month, then 0.2 to 0.4 mg/L from 1 to 3 months, and 0.1 to 0.3 mg/L from 3 to 6 months.[1-4]

Mammary epithelial trace element active transporters regulate milk iron content and are believed to be responsible for insulating milk iron levels from changes in maternal iron status.[5] However, severe maternal malnutrition and anemia can lead to lower milk iron levels.

Maternal Levels. In a study of 75 postpartum women in India, the average milk iron level at 12 to 18 days postpartum was 0.69 mg/L in women with severe anemia, defined as a hemoglobin level ≤6 grams/dL during the third trimester, compared to 0.74 to 0.79 mg/L in those with less severe anemia, and 0.83 mg/L in those with hemoglobin ≥ 11grams/dL.[6]

A similar study in Cairo, Egypt reported an average milk level of 0.29 mg/L in malnourished, severely anemic mothers compared to 0.78 mg/L and 1.6 mg/L in mildly anemic and non-anemic mothers, respectively.[7]

A study of 212 non-malnourished and mostly non-anemic mothers in West Java, Indonesia identified a 1.9% and 0.4% change in milk iron concentration for every 1 gram/L change in maternal hemoglobin and 1 mcg/L change in serum ferritin, respectively, but milk iron levels were not associated with maternal dietary iron intake.[8] A lack of correlation between milk levels and maternal dietary iron intake has also been reported in similar studies.[9-11]

In 62 healthy and well-nourished, lactating mothers from Valencia, Italy taking 0 to 160 mg of supplemental elemental iron daily (exact doses not given), average milk iron levels were 0.57 mg/L and 0.5 mg/L on day 3 and day 15 postpartum, respectively. There was no linear relationship between iron dose and milk iron level.[1]

Forty-seven non-anemic, lactating mothers in Ankara, Türkiye randomly received 80 mg elemental iron daily as ferrous sulfate or placebo beginning 10 to 20 days postpartum and continued for 4 months. Average milk iron levels changed from 0.58 mg/L at baseline to 0.37 mg/L at 4 months in the iron supplemented group, compared to 0.51 mg/L and 0.39 mg/L, respectively, in the placebo group. The difference in percent change from baseline between the two groups was not significant.[12]

Twenty-eight breastfeeding women in Rio de Janeiro, Brazil with normal baseline iron status who received oral iron supplements during pregnancy as part of their routine prenatal care were randomized to receive 40 mg elemental iron as ferrous sulfate or no iron, once daily beginning at 1 or 2 days postpartum and continuing for 3 months. Milk iron levels were approximately 1 mg/L in both groups at baseline. At 30 to 40 days postpartum, average milk iron levels were approximately 0.7 mg/L in both groups. At 90 to 100 days, milk levels were 0.7 mg/L in the supplemented group and 0.55 mg/L in the nonsupplemented group, but were not significantly different. However, the percentage of milk protein as lactoferrin was significantly higher in the supplemented group.[13] High milk lactoferrin has also been reported in populations with high dietary iron intake.[2] The clinical relevance of this observation is not established.

Among 145 healthy women between 20 and 60 days postpartum in Marilia, Brazil who donated breastmilk to a milk bank, those who reported taking an iron supplement during lactation had average milk iron levels of 0.3 mg/L compared to 0.4 mg/L in those who did not take an iron supplement. The exact doses of those in the iron group were not given.[14]

Thirty-two exclusively breastfeeding and well-nourished women in Warsaw, Poland who were 4 to 6 weeks postpartum provided 4 milk samples in a single day in addition to completing an extensive dietary history. Almost half of the participants reported taking a dietary supplement that contained a low dose of iron, around 30 mg or less daily. The average milk iron level in the entire group was 0.39 mg/L. Milk iron level was not correlated with the maternal supplemental iron dose, but was correlated with the total iron intake from food and supplement.[15]

Nineteen well-nourished but mildly anemic lactating mothers from Trujillo, Peru were given 100 mg elemental iron as ferrous sulfate once daily beginning on postpartum day 2. Average milk iron level was 0.90 mg/L at baseline and 0.38 mg/L at 30 days postpartum, compared to 0.8 mg/L and 0.35 mg/L, respectively in 10 other non-anemic lactating mothers who did not receive supplementation. Because no anemic control group was included in the study it is not clear if iron supplementation made a difference, although milk levels in the anemic group were not significantly different from the non-anemic group at 30 days which would indicate such an intervention is at least safe.[16]

Sixty-five healthy women in Copenhagen, Denmark with postpartum hemorrhage within 48 hours of delivery were randomized to receive oral or intravenous iron to improve hematopoietic recovery. Women randomized to the oral group received an average of 45 mg elemental iron daily (salt form not stated) in the first three days of the study as they transitioned from their prenatal vitamins to high-dose oral supplementation, and then 90 mg daily from day 4 to day 8. Milk was collected 2 to 4 days after iron initiation and again at 6 to 8 days. Average milk levels were 0.4 mg/L and 0.44 mg/L, respectively.[17]

In a U.S. study of 63 postpartum, lactating, mostly white, women taking a daily prenatal or multivitamin, those on a vegan or vegetarian diet had similar milk iron levels to those on an omnivore diet.[18]

Infant Levels. One-hundred thirty-one non-anemic, lactating mothers in Ankara, Türkiye randomly received 80 mg elemental iron daily as ferrous sulfate or placebo beginning 10 to 20 days postpartum and continued for 4 months. Average serum iron levels in the iron group infants at 4 months was 0.4 mg/L compared to 0.46 mg/L in the placebo group.[19]

In a study of 1066 breastfeeding infants born to mothers living in rural Bangladesh who randomly received 30 mg or 60 mg elemental iron as ferrous fumarate once daily beginning during their second trimester and continuing postpartum, there were no differences in the frequency of infant anemia, or blood iron indices, at 6 months postpartum between the groups.[20]

Although iron levels are lower in milk than infant formula (<1 mg/L vs 10 to 15 mg/L), human milk iron is more bioavailable. Infant iron stores are similar in breastfed and formula-fed term infants born to non-anemic mothers who took an iron-containing prenatal vitamin during pregnancy.[21]

### Effects in Breastfed Infants

One-hundred thirty-one non-anemic, lactating mothers in Ankara, Türkiye randomly received 80 mg elemental iron as ferrous sulfate daily or placebo beginning 10 to 20 days postpartum and continued for 4 months. Hematological indices and biochemical iron status values were no different between the two groups of infants at the end of the study.[19]

### Effects on Lactation and Breastmilk

Iron-enriched human milk fortifier intended for preterm hospitalized infants increases milk microbial growth compared to iron-free fortifier under in vitro experimental conditions.[22] The clinical consequences of these findings have not been evaluated. Such studies tested milk iron concentrations in the range of 13 to 14 mg/L, which were common for fortifiers in the countries where the studies were conducted. Currently available U.S. premature infant milk fortifier provides a much lower iron supplemental dose resulting in a milk iron level of 3 mg/L above the mother’s underlying milk level.

### Alternate Drugs to Consider

Ferric Carboxymaltose, Ferric Derisomaltose, Iron Sucrose

### References

1 Silvestre MD, Lagarda MJ, Farré R, et al. A study of factors that may influence the determination of copper, iron, and zinc in human milk during sampling and in sample individuals. Biol Trace Elem Res 2000;76:217-27.11049220
2 Lönnerdal B. Iron and breastmilk. In: Stekel A, ed. Iron nutrition in infancy and childhood. New York: Raven Press; 1984:95-117.
3 Dorea JG. Iron and copper in human milk. Nutrition 2000;16:209-20.10705077
4 Trinta VO, Padilha PC, Petronilho S, et al. Total metal content and chemical speciation analysis of iron, copper, zinc and iodine in human breast milk using high-performance liquid chromatography separation and inductively coupled plasma mass spectrometry detection. Food Chem 2020;326:126978.32413760
5 Lönnerdal B. Trace element transport in the mammary gland. Annu Rev Nutr 2007;27:165-77.17506666
6 Kumar A, Rai AK, Basu S, et al. Cord blood and breast milk iron status in maternal anemia. Pediatrics 2008;121:e673-7.18310187
7 El-Farrash RA, Ismail EA, Nada AS. Cord blood iron profile and breast milk micronutrients in maternal iron deficiency anemia. Pediatr Blood Cancer 2012;58:233-8.21548016
8 Gibson RS, Rahmannia S, Diana A, et al. Association of maternal diet, micronutrient status, and milk volume with milk micronutrient concentrations in Indonesian mothers at 2 and 5 months postpartum. Am J Clin Nutr 2020;112:1039-50.32844187
9 Daniels L, Gibson RS, Diana A, et al. Micronutrient intakes of lactating mothers and their association with breast milk concentrations and micronutrient adequacy of exclusively breastfed Indonesian infants. Am J Clin Nutr 2019;110:391-400.31152543
10 Dror DK, Allen LH. Overview of nutrients in human milk. Adv Nutr 2018;9 (Suppl 1):278S-94S.29846526
11 Domellöf M, Lönnerdal B, Dewey KG, et al. Iron, zinc, and copper concentrations in breast milk are independent of maternal mineral status. Am J Clin Nutr 2004;79:111-5.14684406
12 Yalçin SS, Baykan A, Yurdakök K, et al. The factors that affect milk-to-serum ratio for iron during early lactation. J Pediatr Hematol Oncol 2009;31:85-90.19194189
13 Zapata CV, Donangelo CM, Trugo NMF. Effect of iron supplementation during lactation on human-milk composition. J Nutr Biochem 1994;5:331-7. doi:10.1016/0955-2863(94)90062-0
14 Mello-Neto J, Rondo PH, Oshiiwa M, et al. Iron supplementation in pregnancy and breastfeeding and iron, copper and zinc status of lactating women from a human milk bank. J Trop Pediatr 2013;59:140-4.23070740
15 Bzikowska-Jura A, Sobieraj P, Michalska-Kacymirow M, et al. Investigation of iron and zinc concentrations in human milk in correlation to maternal factors: An observational pilot study in Poland. Nutrients 2021;13:303.33494328
16 Zavaleta N, Nombera J, Rojas R, et al. Iron and lactoferrin in milk of anemic mothers given iron supplements. Nutr Res 1995;15:681-90. doi:10.1016/0271-5317(95)00035-h
17 Holm C, Thomsen LL, Norgaard A, et al. Iron concentration in breast milk normalised within one week of a single high-dose infusion of iron in randomised controlled trial. Acta Paediatr 2017;106:256-60.27883237
18 Perrin MT, Pawlak R, Judd N, et al. Major and trace mineral composition of milk from lactating women following vegan, vegetarian and omnivore diets. Br J Nutr 2023;130:1005-12.36562211
19 Baykan A, Yalçın SS, Yurdakök K. Does maternal iron supplementation during the lactation period affect iron status of exclusively breast-fed infants? Turk J Pediatr 2006;48:301-7.17290563
20 Eneroth H, El Arifeen, S, Persson LA, et al. Maternal multiple micronutrient supplementation has limited impact on micronutrient status of Bangladeshi infants compared with standard iron and folic acid supplementation. J Nutr 2010;140:618-24.20053938
21 Stoffel NU, Cepeda-López AC, Zeder C, et al. Measurement of iron absorption and iron gains from birth to 6 months in breastfed and formula-fed infants using iron isotope dilution. Sci Adv 2024;10:eado4262.38985881
22 Taylor SN. ABM Clinical Protocol #29: Iron, zinc, and vitamin D supplementation during breastfeeding. Breastfeed Med 2018;13:398-404.30016173

## Substance Identification

### Substance Name

Iron Salts

### CAS Registry Number

7439-89-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Ferrous Compounds

Hematinics

Iron Compounds

Minerals